# Alglucerase

CASRN: 37228-64-1

## Drug Levels and Effects

### Summary of Use during Lactation

Alglucerase is the placenta-derived form of the enzyme, beta-glucocerebrosidase that is a normal component of human milk. Studies with alglucerase and synthetic forms of the enzyme have found very low levels of the enzyme in breastmilk. Absorption is unlikely because it is probably destroyed in the infant’s gastrointestinal tract.[1,2]. International panels of clinicians that treat Gaucher’s disease recommend breastfeeding with enzyme replacement theapy such as alglucerase.[2,3] Consider limiting the duration of breastfeeding to about 6 months to avoid excessive bone loss in the nursing mother.[2–4]

### Drug Levels

Maternal Levels. One woman received 60 units/kg of alglucerase intravenously. Alglucerase appeared in breastmilk in levels above the baseline control values at 2, 6, 12, 24 and 48 hours postinfusion. Concentrations ranged between 69 and 187 ng/L above baseline.[5]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

One woman received alglucerase 30 international units/kg intravenously every 2 weeks during pregnancy and lactation. Her breastfed infant reportedly grew and developed normally.[6]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Imiglucerase, Taliglucerase Alfa

### References

1 Belmatoug N. Considerations for pregnant patients with Gaucher disease: Challenges for the patient and physician. Clin Ther 2009;31 (Suppl. C):S192–S3. doi:10.1016/S0149-2918(09)80019-2
2 Zimran A, Morris E, Mengel E, . The female Gaucher patient: The impact of enzyme replacement therapy around key reproductive events (menstruation, pregnancy and menopause). Blood Cells Molec Dis 2009;43:264–88.19502088
3 Calderón E, Rodríguez-Fernández A, Calderón-Baturone I, . Spanish consensus on managing pregnancy in women with Gaucher disease. Orphanet J Rare Dis 2025;20:146.40155919
4 Granovsky-Grisaru S, Belmatoug N, vom D, S, . The management of pregnancy in Gaucher disease. Eur J Obstet Gynecol Reprod Biol 2011;156:3–8.21269752
5 Esplin J, Greenspoon J, Cheng E, . Alglucerase infusions in pregnant type 1 Gaucher patients. Blood 1993;82(10 Suppl 1):509a.
6 Aporta R, R, Escobar V, JL, Navarro C, AM, . Alglucerase enzyme replacement therapy used safely and effectively throughout the whole pregnancy of a Gaucher disease patient. Haematologica 1998;83:852–3.9825582

## Substance Identification

### Substance Name

Alglucerase

### CAS Registry Number

37228-64-1

### Drug Class

Breast Feeding

Lactation

Milk, Human

Enzymes

Enzyme Replacement Therapy